# Fidaxomicin

CASRN: 873857-62-6

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of fidaxomicin during breastfeeding. Because it is poorly absorbed orally, it is not likely to reach the bloodstream of the infant or cause any adverse effects in breastfed infants.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Clindamycin, Daptomycin, Doxycycline, Linezolid, Trimethoprim-Sulfamethoxazole, Vancomycin

## Substance Identification

### Substance Name

Fidaxomicin

### CAS Registry Number

873857-62-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Macrocyclic Antibiotics